# Sotorasib

CASRN: 2296729-00-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of sotorasib during breastfeeding. Because sotorasib is 89% bound to plasma proteins, the amount in milk is likely to be low. However, because of its potential toxicity in the breastfed infant, the manufacturer recommends that breastfeeding be discontinued during sotorasib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Sotorasib

### CAS Registry Number

2296729-00-3

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Enzyme Inhibitors